# Oxazepam

CASRN: 604-75-1

## Drug Levels and Effects

### Summary of Use during Lactation

Oxazepam has low levels in breastmilk, a short half-life relative to many other benzodiazepines, and is administration directly to infants. Oxazepam would not be expected to cause any adverse effects in breastfed infants with usual maternal dosages. A safety scoring system finds oxazepam possible to use during breastfeeding.[1] Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Oxazepam is a short-acting metabolite of diazepam.

Maternal Levels. In one mother who took oxazepam 15 to 30 mg daily, oxazepam concentration in breastmilk was about 10% that of the mother's serum from samples taken immediately before oxazepam doses and 4 hours later. The concentration of oxazepam in 12 breastmilk samples during the first 2 weeks postpartum varied between 11 and 26 mcg/L, whereas the concentration of conjugated oxazepam was less than 5 mcg/L in all samples.[2]

A mother who was 7 months postpartum was given oxazepam 10 mg orally 3 times daily for 3 days. Milk was collected twice daily in the morning and evening. After the first day, milk levels at the two times fluctuated little and ranged between 24 and 30 mcg/L. The half-life in milk after the last dose was about 12 hours.[3] At this dose, an exclusively breastfed infant would receive about 4 mcg of oxazepam daily or 0.7% of the maternal weight-adjusted dosage.

A woman who had been abusing benzodiazepines was taking diazepam 80 mg of diazepam and 30 mg of oxazepam daily at the time of study. Milk samples were taken before and after the morning feeding following the morning dose of diazepam during a 30-day tapering dosage regimen. The average of the pre- and post-feed oxazepam milk levels were 30 and 22 mcg/L on days 14 and 14 during maternal intake of oxazepam 15 mg daily and diazepam 40 mg daily. The average of the pre- and post-feed oxazepam milk levels were 14 and 13 mcg/L on days 23 and 25 during maternal intake of diazepam 30 mg daily. Oxazepam is a metabolite of diazepam and probably contributed most of the oxazepam to the milk levels at this point.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with major depression was treated with oxazepam and her breastfed infant was reportedly sedated. The dosage of oxazepam, age of the infant and extent of nursing were not reported.[5]

In a telephone follow-up study, 124 mothers who took a benzodiazepine while nursing reported whether their infants had any signs of sedation. Two mothers took oxazepam while breastfeeding and neither reported sedation in her infant.[6]

A French pharmacovigilance center reported a breastfed infant who became sedated while the mother was taking oxazepam. No further information was provided.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lorazepam, Temazepam

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26 30601177
2 Rane A, Sundwall A, Tomson G. Oxazepam withdrawal in the neonatal period. Lakartidningen 1979;76:4416-7 522574
3 Wretlind M. Excretion of oxazepam in breast milk. Eur J Clin Pharmacol 1987;33:209-10 3691611
4 Dusci LJ, Good SM, Hall RW, et al. Excretion of diazepam and its metabolites in human milk during withdrawal from combination high dose diazepam and oxazepam. Br J Clin Pharmacol 1990;29:123-6 2105100
5 Kemp J, Ilett KF, Booth J, et al. Excretion of doxepin and N-desmethyldoxepin in human milk. Br J Clin Pharmacol 1985;20:497-9 4074620
6 Kelly LE, Poon S, Madadi P, et al. Neonatal benzodiazepines exposure during breastfeeding. J Pediatr 2012;161:448-51 22504099
7 Bertin B, Gouraud A, Cottin J, et al. Medication use during breastfeeding: A 5-year experience in the pharmacovigilance center of Lyon. Fundam Clin Pharmacol 2024;38 (Suppl 1):35.doi:10.1111/fcp.13012

## Substance Identification

### Substance Name

Oxazepam

### CAS Registry Number

604-75-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines